# Neratanib

CASRN: 698387-09-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of neratanib during breastfeeding. Because neratanib and its metabolite are over 99% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during neratanib therapy.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Neratanib

### CAS Registry Number

698387-09-6

### Drug Class

- Breast Feeding
- Lactation
- Antineoplastic Agents
- Enzyme Inhibitors
- Protein Kinase Inhibitors
- Signal Transduction Inhibitors